# Teriflunomide

CASRN: 163451-81-8

## Drug Levels and Effects

### Summary of Use during Lactation

Because there is no published experience with teriflunomide during breastfeeding, most sources recommend that it should be avoided during breastfeeding, especially while nursing a newborn or preterm infant.[1–4]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Multiple Sclerosis) Glatiramer, Immune Globulin, Interferon beta, Methylprednisolone, Natalizumab, Ocrelizumab, Ofatumumab, Peginterferon beta

### References

1 Bove R, Alwan S, Friedman JM, . Management of multiple sclerosis during pregnancy and the reproductive years: A systematic review. Obstet Gynecol 2014;124:1157–68.25415167
2 Almas S, Vance J, Baker T, . Management of multiple sclerosis in the breastfeeding mother. Mult Scler Int 2016;2016:6527458.26966579
3 Dobson R, Dassan P, Roberts M, . UK consensus on pregnancy in multiple sclerosis: ‘Association of British Neurologists’ guidelines. Pract Neurol 2019;19:106–14.30612100
4 Shipley J, Beharry J, Yeh W, . Consensus recommendations on multiple sclerosis management in Australia and New Zealand: part 2. Med J Aust 2025;222:365–71.39923190

## Substance Identification

### Substance Name

Teriflunomide

### CAS Registry Number

163451-81-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Immunosuppressive Agents